# Clonidine

CASRN: 4205-90-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the high serum levels found in some breastfed infants, possible infant side effects, and the possible negative effects on lactation, other antihypertensive agents are preferred, especially while nursing a newborn or preterm infant.[1] Clonidine used as a single postpartum dose as a neuraxial analgesia adjunct probably has not been studied, but it may reduce the need for other medications or their dosages, and appears unlikely to affect breastfeeding.[2]

### Drug Levels

Maternal Levels In 9 women taking oral clonidine, milk levels were measured on 3 occasions: 1 to 5 days, 10 to 14 days and 45 to 60 days postpartum. Average daily dosages and approximate milk levels on the for the 3 measurements were 392 mcg daily and 1.8 mcg/L, 309 mcg daily and 2.9 mcg/L, and 242 mcg daily and 1.9 mcg/L. These values were about double those of simultaneous maternal serum concentrations.[3] Using the average milk level data from this study, an exclusively breastfed infant would receive an estimated 4.1 to 8.4% of the maternal weight-adjusted dosage.

In a 4-week-postpartum mother, a milk level of 0.6 mcg/L was found in milk 2.5 hours after a dose while taking a clonidine dosage of 37.5 mcg orally twice daily. Based on this single milk level, the authors estimated that an exclusively breastfed infant would receive a maximum 6.8% of the maternal weight-adjusted dosage with this maternal dosage regimen.[4]

In 3 women who received clonidine 150 mcg twice daily during pregnancy and postpartum, milk levels were measured 12 hours after their previous dose for the first 3 days postpartum. Milk clonidine levels ranged from 0.8 to 2.8 mcg/L.[5]

Infant Levels. A 4-week-old breastfed infant whose mother was taking clonidine 37.5 mcg orally twice daily had an undetectable (<96 ng/L) serum clonidine level 1 hour after nursing.[4]

In the infants of 9 women taking clonidine, infant serum levels were measured on three occasions: 1 to 5 days, 10 to 14 days and 45 to 60 days postpartum. Average daily maternal dosages on the three measurements were 392 mcg daily, 309 mcg daily, and 242 mcg daily, respectively. At these times, the infants had serum clonidine concentrations of 0.69, 0.53 and 0.35 mcg/L, respectively.[3] These values represent an average of about 50% of the simultaneous maternal serum levels.

### Effects in Breastfed Infants

No typical clonidine side effects (e.g., dry mouth, sedation) were seen in 9 infants whose mothers were taking clonidine, despite the infants' serum levels being about half that of their mothers'.[3]

Three infants whose mothers were taking clonidine 150 mcg twice daily were breastfed. During the first 3 days postpartum, no adverse effects on blood glucose, electrocardiogram or blood pressure were noted. The infants had normal growth and psychomotor development at 1 year of age, although the duration of breastfeeding and clonidine use was not stated.[5]

An infant was born to a mother taking clonidine 0.15 mg daily during pregnancy and postpartum. At 2 days of life, the infant presented with drowsiness, hypotonia, and suspected generalized seizures. At day 5, episodes of apnea were noted. On day 9 postpartum, breastfeeding was stopped and all symptoms resolved within 24 hours.[6] Clonidine was probably the cause of the reaction, but the relative contributions of exposure during pregnancy and breastfeeding cannot be determined.

### Effects on Lactation and Breastmilk

Clonidine has complex, dose-related effects on both oxytocin and prolactin secretion. The net effect of the drug on nursing mothers has not been well studied. A case of hyperprolactinemia and gynecomastia occurred in a 6-year-old boy taking clonidine for hyperactivity and valproic acid for a seizure disorder. Galactorrhea ceased within 3 weeks of discontinuing clonidine.[7] A case of clonidine-induced postpartum galactorrhea has also been reported.[8] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

(ADHD) Amphetamine, Dextroamphetamine, Lisdexamfetamine, Methylphenidate (Hypertension) Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Hydrochlorothiazide, Methyldopa, Propranolol

### References

1 Ornoy A. Pharmacological treatment of attention deficit hyperactivity disorder during pregnancy and lactation. Pharm Res 2018;35:46.29411149
2 Martin E, Vickers B, Landau R, et al. ABM Clinical Protocol #28, Peripartum analgesia and anesthesia for the breastfeeding mother. Breastfeed Med 2018;13:164-71.29595994
3 Hartikainen-Sorri AL, Heikkinen JE, Koivisto M. Pharmacokinetics of clonidine during pregnancy and nursing. Obstet Gynecol 1987;69:598-600.3822302
4 Bunjes R, Schaefer C, Holzinger D. Clonidine and breast-feeding. Clin Pharm 1993;12:178-9.8491075
5 Boutroy MJ, Gisonna CR, Legagneur M. Clonidine: Placental transfer and neonatal adaption. Early Hum Dev 1988;17:275-86.3208682
6 Sevrez C, Lavocat MP, Mounier G, et al. [Transplacental or breast milk intoxication to clonidine: A case of neonatal hypotonia and drowsiness]. Arch Pediatr 2014;21:198-200.24411570
7 Mendhekar DN. Clonidine-induced gynecomastia and hyperprolactinemia in a 6-year-old child. J Clin Psychiatry 2005;66:1616-7.16401171
8 Heim J, Massart C, Auvray E, et al. [Post-partum galactorrhea with hyperprolactinaemia persistent during a clonidine treatment]. Sem Hop 1979;55:933-4.

## Substance Identification

### Substance Name

Clonidine

### CAS Registry Number

4205-90-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic alpha-2 Receptor Agonists